# Mavacamten

CASRN: 1642288-47-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of mavacamten during breastfeeding. Because it is 97 to 98% plasma protein bound, the amount of mavacamten in milk is likely to be very low. If a mother requires mavacamten, it is not a reason to discontinue breastfeeding. Until more data become available, mavacamten should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Mavacamten

### CAS Registry Number

1642288-47-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cardiovascular Agents